# Cabotegravir

CASRN: 1051375-10-0

## Drug Levels and Effects

### Summary of Use during Lactation

A pharmacokinetic analysis found low levels of cabotegravir in breastmilk with maternal use of long-acting cabotegravir. Maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2] Extended postnatal prophylaxis of breastfed infants with cabotegravir should continue until breastfeeding is stopped.[3]

### Drug Levels

Maternal Levels. An abstract reports a study in which long-acting cabotegravir 600 mg was injected intramuscularly every 56 days to 27 nursing mothers. Median breastmilk concentrations at these times were 14.6 mcg/L just before the 1-month injection, 29.8 mcg/L one week later, 27.4 mcg/L just before the 5-month injection, and 36.1 mcg/L one week later.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Raltegravir

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Van de Perre P, Moles JP, Nagot N. HIV postnatal prophylaxis: How long is long enough? Expert Rev Anti Infect Ther 2025;23:1075–81.41216942
4 Yoseph M, Momper J, Shava E, et al. Evaluating CAB-LA concentration and breastmilk transfer in postpartum PrEP: Results from the Tshireletso PK substudy. J Int AIDS Soc 2025;28:e26518 2025:e26518. doi:10.1002/jia2.26518

## Substance Identification

### Substance Name

Cabotegravir

### CAS Registry Number

1051375-10-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV Integrase Inhibitors